# Gadoversetamide

CASRN: 131069-91-5

## Drug Levels and Effects

### Summary of Use during Lactation

Gadoversetamide has been withdrawn from the market in the US and several other countries. There is no published experience with gadoversetamide during breastfeeding. Gadoversetamide releases more free gadolinium than some other gadolinium-containing contrast agents. Some European guidelines recommend a 24-hour interruption of breastfeeding after a dose, but guidelines developed by North American professional organizations state that breastfeeding need not be disrupted after a nursing mother receives a gadolinium-containing contrast medium.[1-4] An alternative drug is preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Gadobutrol, Gadoteridol, Gadoterate

### References

1 Copel J, El-Sayed Y, Heine RP, et al. Committee Opinion No. 723: Guidelines for diagnostic imaging during pregnancy and lactation. Obstet Gynecol 2017;130:e210-e6 28937575
2 American College of Radiology Committee on Drugs and Contrast Media. Administration of contrast media to breast-feeding mothers. In, ACR manual on contrast media. 2023;Version 2023:120-1. https://www.acr.org/Clinical-Resources/Contrast-Manual
3 European Society of Urogenital Radiology. ESUR guidelines on contrast media. 2018;Version 10.0.http://www.esur-cm.org/index.php/en/
4 Bookwalter CA, McDonald RJ, Packard AT, et al. Contrast media in pregnant and lactating patients, from the AJR special series on contrast media. AJR Am J Roentgenol 2024;224:e2431415 39046138

## Substance Identification

### Substance Name

Gadoversetamide

### CAS Registry Number

131069-91-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Diagnostic Agents